# Heparin

CASRN: 9005-49-6

## Drug Levels and Effects

### Summary of Use during Lactation

Although heparin itself has not been studied, low molecular weight heparins (e.g., dalteparin, enoxaparin) are not excreted into breastmilk in clinically relevant amounts. Because heparin has an even higher molecular weight of 3000 to 30,000 daltons, it would not be expected to be appreciably excreted into breastmilk or absorbed by the infant. No special precautions are required.[1,2]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acenocoumarol, Dalteparin, Enoxaparin, Heparin, Rivaroxaban, Warfarin

### References

1 Bates SM, Greer IA, Middeldorp S, et al. VTE, thrombophilia, antithrombotic therapy, and pregnancy: Antithrombotic Therapy and Prevention of Thrombosis, 9th ed: American College of Chest Physicians Evidence-Based Clinical Practice Guidelines. Chest 2012;141:e691S-736S.
2 Bates SM, Rajasekhar A, Middeldorp S, et al. American Society of Hematology 2018 guidelines for management of venous thromboembolism: Venous thromboembolism in the context of pregnancy. Blood Adv 2018;2:3317-59.30482767

## Substance Identification

### Substance Name

Heparin

### CAS Registry Number

9005-49-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticoagulants